# Zaleplon

CASRN: 151319-34-5

## Drug Levels and Effects

### Summary of Use during Lactation

Little information is available on the use of zaleplon during breastfeeding. A safety scoring system finds zaleplon to be not recommended during breastfeeding.[1] However, the low levels of zaleplon in breastmilk and its short half-life indicate that amounts ingested by the infant are small and would not be expected to cause any adverse effects in older breastfed infants. Other agents may be preferred in newborn and preterm infants. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Five nursing mothers who were at least 14 days postpartum were given a single oral dose of zaleplon 10 mg. The peak milk level averaged 14 mcg/L at 1.2 hours after the dose. The mean half-life in milk was 1.1 hours.[2] Using the peak milk level data from this study, an exclusively breastfed infant would receive an estimated maximum of 2.1 mcg/kg daily with this maternal dosage regimen or about 1.4% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zolpidem

### References

1 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
2 Darwish M, Martin PT, Cevallos WH, et al. (1999). Rapid disappearance of zaleplon from breast milk after oral administration to lactating women. J Clin Pharmacol.

## Substance Identification

### Substance Name

Zaleplon

### CAS Registry Number

151319-34-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives